# Dimethyl Sulfoxide

CASRN: 67-68-5

## Drug Levels and Effects

### Summary of Use during Lactation

The concentration of dimethyl sulfoxide (DMSO) has been measured in breastmilk in only one patient after a 15-minute retention in the bladder. The amount in milk is trivial, but its metabolite was not measured and whether it changes the odor or taste of milk was not determined. At most, only about 16% of DMSO in the bladder is absorbed systemically, compared to about 70% after oral administration, so this study does not represent the amount an infant would receive after oral intake by the mother.[1,2]

### Drug Levels

Dimethyl sulfoxide is slowly metabolized to dimethyl sulfone after absorption.

Maternal Levels. One nursing mother received a treatment for interstitial cystitis/bladder pain syndrome (IC/BPS) consisting of a single instillation of 50 mL of 50% DMSO into the bladder, which was voided after 15 minutes. Milk samples were obtained before instillation and 5, 11, 19, 24, 27, 32, and 36 hours after the treatment. DMSO was analyzed, but its metabolite, dimethylsulfone, was not measured. A peak milk DMSO concentration of 34.5 mg/L occurred at 5 hours after the treatment. The average milk DMSO concentration was 13.4 mg/L, which resulted in an estimated daily dosage of 2 mg/kg for the infant and a relative infant dosage of 0.45%.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Hucker HB, Miller JK, Hochberg A, et al. Studies on the absorption, excretion and metabolism of dimethylsulfoxide (DMSO) in man. J Pharmacol Exp Ther 1967;155:309–17.6025521
2 Shimada H, Yono M, Hojo Y, et al. Phase I study of KRP-116D, a 50% w/w dimethyl sulfoxide aqueous solution, on the systemic absorption from bladder by intravesical instillation in healthy Japanese subjects. Low Urin Tract Symptoms 2020;12:150–4.31696635
3 Yamada E, Speck E, Datta P. Bladder to breast milk-DMSO treatment of interstitial cystitis. Breastfeed Med 2026;21:452–4.42175747

## Substance Identification

### Substance Name

Dimethyl Sulfoxide

### CAS Registry Number

67-68-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cryoprotective Agents

Solvents

Free Radical Scavengers